# Telavancin

CASRN: 372151-71-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of telavancin during breastfeeding. Telavancin is 93% plasma protein bound and is poorly absorbed orally, so it is not likely to appear in milk in large amounts, reach the infant’s bloodstream or cause any adverse effects in breastfed infants. If telavancin is required by the mother, it is not a reason to discontinue breastfeeding. Monitor the infant for possible effects on the gastrointestinal tract, such as diarrhea, vomiting, and candidiasis (e.g., thrush, diaper rash).

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Clindamycin, Daptomycin, Doxycycline, Trimethoprim-Sulfamethoxazole, Vancomycin

## Substance Identification

### Substance Name

Telavancin

### CAS Registry Number

372151-71-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Glycopeptides

Lipoglycopeptides